# Anagrelide

CASRN: 68475-42-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of anagrelide during breastfeeding. The manufacturer recommends that the drug not be used during breastfeeding and for 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

anagrelide

### CAS Registry Number

68475-42-3

### Drug Class

Breast Feeding

Lactation

Fibrinolytic Agents

Platelet Aggregation Inhibitors